# Colchicine

CASRN: 64-86-8

## Drug Levels and Effects

### Summary of Use during Lactation

Long-term prophylactic maternal doses of colchicine up to 1.5 mg daily produce levels in milk that result in the infant receiving less than 10% of the maternal weight-adjusted dosage. The highest milk levels occur 2 to 4 hours after a dose, so avoiding breastfeeding during this time can minimize the infant dose, although some clinicians simply recommend taking the drug after nursing. No adverse effects in breastfed infants have been reported in case series and a case-control study and many experts and professional guidelines consider colchicine safe during breastfeeding in women being treated for familial Mediterranean fever or rheumatic conditions.[1-5]

### Drug Levels

Maternal Levels. A woman receiving long-term oral colchicine 0.6 mg daily had milk levels of colchicine measured 5 times between 16 and 21 days postpartum. Twice, colchicine was undetectable (<0.5 mcg/L) in milk 40 minutes after a dose. On other occasions, milk colchicine levels were 1.2 mcg/L 40 minutes after a dose, 2.5 mcg/L 50 minutes after a dose and 1.7 mcg/L 55 minutes after a dose.[6]

A woman taking colchicine 1 mg orally once daily had breastmilk colchicine levels of 31 mcg/L at 2 hours after a dose and 24 mcg/L 4 hours after the dose on day 5 postpartum; and 27 mcg/L at 4 hours after the dose and 10 mcg/L at 7 hours after the dose on day 15 postpartum. Using the maximum milk level, the authors estimated that an exclusively breastfed infant would receive 10% of the maternal weight-adjusted dosage in the 8 hours after a dose. They suggested giving colchicine at nighttime and not nursing for 8 hours to minimize infant colchicine exposure.[7]

Four women were receiving long-term colchicine therapy 1 to 1.5 mg once daily. Milk samples were taken before and 1, 3 and 6 hours after a colchicine dose on days 4, 6, 21 and 58 of nursing, respectively, in the 4 women. Colchicine was detectable in all milk samples, including the 24-hour predose samples which were less than 1 mcg/L. Peak milk levels occurred 1 hour after the dose in 3 women and 3 hours after the dose in the fourth. Peak milk levels ranged from 1.98 and 8.6 mcg/L. At 6 hours after the dose, milk levels ranged from 0.87 and 2.57 mcg/L. Although the authors did not specify which mothers were taking which dose, milk levels were much higher (>1.5 times higher) in the mothers who were 4 and 6 days postpartum compared to those who were 21 and 58 days postpartum. Using the highest measured milk levels, the authors estimated that an exclusively breastfed infant would receive 1.2 mcg/kg daily or less than 10% of an adult colchicine dose.[1]

Infant Levels. Colchicine was undetectable (<5 mcg/L) in 12-hour urine samples taken from a breastfed infant at 5 and 15 days of age whose mother was taking 1 mg of colchicine once daily.[7]

### Effects in Breastfed Infants

In 4 infants whose mothers were taking 1 to 1.5 mg of colchicine daily prophylactically for familial Mediterranean fever, no apparent effects were noted on clinical follow-up over at least 10 months. The authors also reported that they recalled another 6 women who breastfed their infants for at least 3 months during colchicine therapy (dosage not stated) and follow-up for at least 2 years revealed no clinical or developmental problems.[1]

An infant was breastfed (extent not stated) for 6 months during maternal intake of colchicine 0.6 mg twice daily. No apparent adverse effects were noted.[6]

In a study of mothers who took colchicine during pregnancy, 111 of 181 mothers reported breastfeeding (extent not stated) their infants. None of the infants reportedly had colchicine-related adverse effects.[8]

A case-control study compared 37 women who took colchicine during breastfeeding their 38 infants to a matched control group of 75 mothers who had taken amoxicillin, but were unexposed to colchicine, and their 76 breastfed infants. Telephone follow-up occurred at 6 to 48 months (average 28 months) after the initial inquiry. Among the colchicine-exposed group, 76% of infants were exclusively breastfed and the mean overall duration of breastfeeding was 9.1 months. No increased risk of adverse effects was noted in the colchicine-exposed infants compared to the control infants. Specifically, no differences in gastrointestinal symptoms, or growth and development parameters were seen.[3]

Ten nursing mothers who were being treated with colchicine were reported. None of them had any pathology reported.[9]

A woman was treated with anakinra 100 mg subcutaneously and oral colchicine 1 mg twice daily during pregnancy and postpartum for familial Mediterranean fever while she breastfed her infant (extent not specified). At 9 months of age, the infant’s development was within normal range. The routine vaccination schedule for the baby was being performed on time and there was no history of infection in the infant.[10]

A woman with recurrent pericarditis was treated with subcutaneous anakinra 100 mg once weekly beginning in the fifth month of pregnancy and continuing postpartum. She also took colchicine 0.5 mg daily. She delivered twins by cesarean section at 36 weeks of gestation and breastfed (extent not stated) her infants up to 18 months of age. No health problems were noted in the infants up to 18 months of age.[11]

A case series reported 10 mothers from 4 European countries who were treated with anakinra for pericarditis who breastfed their infants (extent not stated), including one woman who breastfed two infants following 2 pregnancies. Doses ranged from 100 mg once a week to 100 mg once daily. Two of the women also took colchicine 1 mg daily. The infants had no reported infections or developmental abnormalities.[12]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ibuprofen, Indomethacin

### References

1 Ben-Chetrit E, Scherrmann JM, Levy M. Colchicine in breast milk of patients with familial Mediterranean fever. Arthritis Rheum 1996;39:1213–7.8670333
2 Dotters-Katz S, Kuller J, Price T. The impact of familial Mediterranean fever on women's health. Obstet Gynecol Surv 2012;67:357–64.22713162
3 Herscovici T, Merlob P, Stahl B, et al. Colchicine use during breastfeeding. Breastfeed Med 2015;10:92–5.25646562
4 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529–56.32090480
5 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
6 Milunsky JM, Milunsky A. Breast-feeding during colchicine therapy for familial Mediterranean fever. J Pediatr 1991;119 (1 Pt 1):164.2066854
7 Guillonneau M, Aigrain EJ, Galliot M, et al. Colchicine is excreted at high concentrations in human breast milk. Eur J Obstet Gynecol Reprod Biol 1995;61:177–8.7556843
8 Diav-Citrin O, Shechtman S, Schwartz V, et al. Pregnancy outcome after in utero exposure to colchicine. Am J Obstet Gynecol 2010;203:144.e1–6.20579964
9 Duman NC, Medine I, Gulcebi MI, et al. Assessment of colchicine use during pregnancy and breastfeeding in a university hospital. Reprod Toxicol 2016;60:179. doi:10.1016/j.reprotox.2016.03.022
10 Duman NC, Goren MZ, Karaalp A. Anakinra use during pregnancy and lactation: A case report. Reprod Toxicol 2019;88:139–40. doi:10.1016/j.reprotox.2019.05.029
11 Negro E, Costedoat-Chalumeau N, Nivuori M, et al. Anakinra during pregnancy in a difficult to treat case of recurrent pericarditis. Can J Cardiol 2023;39:1152–3.36306922
12 Trotta L, Mascolo R, Mardygan V, et al. Use of anakinra during pregnancy and breastfeeding in women with recurrent pericarditis: A case series. Eur J Obstet Gynecol Reprod Biol 2025;312:114553.40609313

## Substance Identification

### Substance Name

Colchicine

### CAS Registry Number

64-86-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antigout Agents

Antimitotic Agents

Gout Suppressants